# Alfalfa

CASRN: 8015-60-9

## Drug Levels and Effects

### Summary of Use during Lactation

Alfalfa (Medicago sativa) leaves and sprouts contain saponins, estrogenic isoflavonoids (e.g., daidzein, genistein), vitamin K, and the amino acid L-canavanine. Alfalfa is a purported galactogogue and is included in some proprietary mixtures promoted to increase milk supply;[1-5] however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[6,7] Daidzein and genistein are excreted into breastmilk in small amounts,[8-11] but have not been measured specifically after alfalfa intake. No data exist on the excretion of other components of alfalfa into breastmilk or on the safety and efficacy of alfalfa in nursing mothers or infants. Alfalfa is generally well tolerated and is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration. Worsening of systemic lupus erythematosus has been reported, possibly caused by immune system stimulation by L-canavanine. Because of its vitamin K content, alfalfa should be avoided in persons taking warfarin.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Eriksson R, Fransson GB, Kylberg E. (1983). Jordemodern.
2 Kopec K. (1999). Herbal medications and breastfeeding. J Hum Lact.
3 Allaire AD, Moos MK, Wells SR. (2000). Complementary and alternative medicine in pregnancy: A survey of North Carolina certified nurse-midwives. Obstet Gynecol.
4 Scott CR, Jacobson H. (2005). A selection of international nutritional and herbal remedies for breastfeeding concerns. Midwifery Today Int Midwife.
5 Alachkar A, Jaddouh A, Elsheikh MS, et al. (2011). Traditional medicine in Syria: Folk medicine in Aleppo governorate. Nat Prod Commun.
6 Brodribb W. ABM Clinical Protocol #9. (2018). Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med.
7 (2021). Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol.
8 Franke AA, Custer LJ, Tanaka Y. (1998). Isoflavones in human breast milk and other biological fluids. Am J Clin Nutr.
9 Franke AA, Custer LJ, Wang W, et al. (1998). HPLC analysis of isoflavonoids and other phenolic agents from foods and from human fluids. Proc Soc Exp Biol Med.
10 Choi MH, Kim KR, Hong JK, et al. (2002). Determination of non-steroidal estrogens in breast milk, plasma, urine and hair by gas chromatography/mass spectrometry. Rapid Commun Mass Spectrom.
11 Min J, Wang Z, Liang C, et al. (2020). Detection of phytoestrogen metabolites in breastfed infants' urine and the corresponding breast milk by liquid chromatography-tandem mass spectrometry. J Agric Food Chem.

## Substance Identification

### Substance Name

Alfalfa

### Scientific Name

Medicago sativa

### CAS Registry Number

8015-60-9

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Food

Phytotherapy; Plants

Medicinal